# Haemophilus Vaccines

## Drug Levels and Effects

### Summary of Use during Lactation

Although there is some conflicting information on the effect of breastfeeding on infants' antibody response to Haemophilus influenzae type b vaccines, there is no evidence that breastfeeding reduces protection against the disease. Vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to the Haemophilus influenzae vaccine.[1,2]

Breastfeeding alone appears to increase antibodies against Haemophilus influenzae and reduce the incidence of Haemophilus influenzae type b meningitis.[3-5] Breastfeeding also appears to reduce infant side effects associated with routine childhood immunization. Breastfed infants should be vaccinated according to the routine recommended schedules.

### Drug Levels

Maternal Levels. A study compared colostrum and milk antibody levels following maternal immunization with Haemophilus influenzae type b polysaccharide vaccine at 3 time periods. Women who were immunized at 24 to 26 weeks of pregnancy had higher antibody levels in colostrum (average 21 mg/L) and in breastmilk at 3 or 6 months after delivery (average 3.1 mg/L) than women who were immunized 1 to 8 months before pregnancy (average 0.13 mg/L at 3 or 6 months postpartum) or those who had not been immunized (average 0.91 mg/L in colostrum, and 0.09 mg/L at 3 or 6 months postpartum).[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Breastfed infants are less likely to have fever and may be less likely to experience anorexia and reduced energy intake after routine childhood immunization than those who are not breastfed.[7,8]

In 2 studies, breastfed infants had higher antibody titers against Haemophilus influenzae type b than formula-fed infants at 7 and 12 months of age after vaccination with a Haemophilus influenzae type b conjugate vaccine.[2,9] In another study, infants breastfed for longer than 90 days had a better antibody response to the vaccine at 13 months of age than those breastfed less than 90 days.[10]

In a study of 408 infants immunized with Haemophilus influenzae type b polysaccharide-tetanus toxoid conjugate vaccine, no difference in antibody titer was observed at 7 months between infants breastfed for less than 4 weeks and those who were breastfed for 24 weeks or more. Likewise, no difference in antibody response was found when infants were grouped by breastfeeding less than 1 month or greater than 1 month.[11] Another study of 252 infants who each received one of 4 Haemophilus influenzae type b vaccines found no difference in antibody titers among those who were breastfed and those who were not.[12]

Among 272 infants who were vaccinated with Hib PRP-OMP vaccine at 2 and 4 months postpartum, 101 were breastfed and 171 were formula fed. Of the breastfed infants, 79% were breastfed at least 80% at 7 weeks and 59% at 7 months of age. Breastfed infants had lower IgG titers than formula-fed infants at both 7 weeks and 7 months of age. Although the difference was statistically significant after adjustment for confounding variables, no invasive Haemophilus influenzae type b infections occurred in any of the infants in the study.[13]

A study in Sweden compared the IgG response to Haemophilus b (Hib) vaccine in infants who were either breastfed or randomized to one of 3 different formulas. In a secondary analysis of the results, breastfed infants had significantly lower IgG levels against Hib at 4, 6, and 12 months than formula-fed infants. A significantly higher proportion of the formula-fed infants showed Hib IgG concentrations above the protective levels at 4, 6, and 12 months. The authors could not explain the differences, but felt that the clinical relevance of different IgG responses is most likely limited.[14]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Gruslin A, Steben M, Halperin S, et al. Immunization in pregnancy: No. 220, December 2008. Int J Gynaecol Obstet 2009;105:187–91.19367691
2 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
3 Silfverdal SA, Bodin L, Hugosson S, et al. Protective effect of breastfeeding on invasive Haemophilus influenzae infection: A case-control study in Swedish preschool children. Int J Epidemiol 1997;26:443–50.9169183
4 Silfverdal SA, Bodin L, Olcen P. Protective effect of breastfeeding: An ecologic study of Haemophilus influenzae meningitis and breastfeeding in a Swedish population. Int J Epidemiol 1999;28:152–6.10195681
5 Silfverdal SA, Bodin L, Ulanova M, et al. Expression of idiotypic antibodies-1 and -2 and breastfeeding in relation to antibody levels against Haemophilus influenzae type b in children. Scand J Immunol 2006;63:371–5.16640661
6 Insel RA, Amstey M, Pichichero ME. Postimmunization antibody to the Haemophilus influenzae type b capsule in breast milk. J Infect Dis 1985;152:407–8.3875665
7 Pisacane A, Continisio P, Palma O, et al. Breastfeeding and risk for fever after immunization. Pediatrics 2010;125:e1448–52.20478932
8 López-Alarcón M, Garza C, Habicht JP, et al. Breastfeeding attenuates reductions in energy intake induced by a mild immunologic stimulus represented by DPTH immunization: possible roles of interleukin-1beta, tumor necrosis factor-alpha and leptin. J Nutr 2002;132:1293–8.12042449
9 Pabst HF, Spady DW. Effect of breast-feeding on antibody response to conjugate vaccine. Lancet 1990;336:269–70.1973970
10 Silfverdal SA, Ekholm L, Bodin L. Breastfeeding enhances the antibody response to Hib and pneumococcal serotype 6B and 14 after vaccination with conjugate vaccines. Vaccine 2007;25:1497–502.17097198
11 Scheifele D, Bjornson GJ, Guasparini R, et al. Breastfeeding and antibody responses to routine vaccination in infants. Lancet 1992;340:1406.1360102
12 Decker MD, Edwards KM, Bradley R, et al. Comparative trial in infants of four conjugate haemophilus influenzae type b vaccines. J Pediatr 1992;120:184–9.1735812
13 Hawkes JS, Makrides M, Roberton DM, et al. Responses to immunisation with Hib conjugate vaccine in Australian breastfed and formula-fed infants. J Paediatr Child Health 2007;43:597–600.17688643
14 Björmsjö M, Ekström N, Silfverdal SA, et al. Vaccine response was higher in formula-fed infants compared to breastfed but not affected by lactoferrin or iron in a randomised controlled trial. Acta Paediatr 2024;113:2266–74.38934330

## Substance Identification

### Substance Name

Haemophilus Vaccines

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines